# Dandelion

## Drug Levels and Effects

### Summary of Use during Lactation

Dandelion (Taraxacum officinale) herb contains vitamins, minerals, terpenoids, caffeic acid, and numerous other compounds. Dandelion root contains high concentrations of inulin. Dandelion is a purported galactogogue;[1,2] however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[3,4] Except for the vitamins and minerals, no data exist on the excretion of any of the pharmacologically active components of dandelion into breastmilk or on the safety and efficacy of dandelion in nursing mothers or infants. Dandelion is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. It rarely can cause allergic reactions, diarrhea, and gastrointestinal upset. Use during lactation is unlikely to harm the breastfed infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Belew C. Herbs and the childbearing woman. Guidelines for midwives. J Nurse Midwifery 1999;44:231-52.10380443
2 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
3 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
4 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531

## Substance Identification

### Substance Name

Dandelion

### Scientific Name

Taraxacum officinale

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal